# Propofol

CASRN: 2078-54-8

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of propofol in milk are very small and are not expected to be absorbed by the infant. Although one expert panel recommends withholding nursing for an unspecified time after propofol administration, most recommend that breastfeeding can be resumed as soon as the mother has recovered sufficiently from general anesthesia to nurse and that discarding milk is unnecessary.[1-4] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. General anesthesia for cesarean section using propofol as a component for induction may delay the onset of lactation. In one study, breastfeeding before general anesthesia induction reduced requirements of propofol and sevoflurane compared to those of nursing mothers whose breastfeeding was withheld or nonnursing women.[5] Case reports have noted blue-green or green discoloration of breastmilk after nursing mothers received propofol.

### Drug Levels

Maternal Levels. Five women who had undergone general anesthesia with propofol intravenously shortly after delivery had colostrum propofol levels measured. All of the women received 2 mg/kg intravenously over 20 seconds at time zero followed by a continuous infusion. In 3 women who received 0.25 to 0.37 mg/kg/minute, propofol was detectable in colostrum, but not quantifiable because of technical difficulties. In a woman who received 0.42 mg/kg/minute for 7 minutes, the highest colostrum level was 1.53 mg/L at 15 minutes after the start of the infusion. Colostrum levels decreased to 0.12 mg/L over the next 8 hours. Another woman who received 0.18 mg/kg/minute for 6 hours, the highest colostrum level was 4.91 mg/L at 30 minutes after the start of the infusion.[6]

Four women received a single intravenous bolus dose of propofol 2.5 mg/kg prior to cesarean section. Colostrum levels averaged 0.17 mg/L (range 0.14 to 0.24 mg/L) in 3 of the women 4 hours after the dose and 0.14 mg/L (range 0.089 to 0.19 mg/L) in 4 of the women 8 hours after the dose. In the same report, 3 women received a bolus dose of propofol 2.5 mg/kg followed by a continuous infusion of 5 mg/kg/hour. In one patient, colostrum level was 0.33 mg/L at 4 hours after the bolus; a second patient had levels of 0.74 mg/L at 5 hours and 0.048 mg/L at 8 hours after the bolus; a third patient had a colostrum level of 0.036 mg/L at 6 hours after the bolus.[2]

Five women who were 6 to 15 weeks postpartum were given a single dose of 2.5 mg/kg of propofol intravenously before undergoing general anesthesia. Several milk samples were collected between 5 and 24 hours after the injection from each woman. The authors estimated that the infants would receive an average of 0.0052 mg/kg in the 24 hours after a single dose of propofol. This corresponds to 0.2% of the maternal weight-adjusted dosage. The women's milk output following the surgical procedure was less than half of the normal milk output of nursing mothers. The authors concluded that this amount of propofol in milk is unlikely to affect a healthy, term infant.[3] The infants of mothers not undergoing a surgical procedure might receive a greater dose of propofol in breastmilk, but it would be unlikely to be a large dose.

A woman received 474 mg of propofol by controlled infusion during a procedure to terminate an ectopic pregnancy. The first milk she pumped 8 hours after the procedure was green in color. Although the authors suspect that propofol was the cause of the discoloration, the woman had also received several other medications during the procedure. Thirty hours later, propofol was detected in a milk sample at a concentration of 24 mcg/L, completely as unconjugated propofol.[7]

Two mothers who were breastfeeding their infants were given propofol doses that targeted a serum concentration of 6.5 mcg/L for anesthesia induction. Propofol was stopped as xenon anesthesia was started. One mother received a total of 350 mg of propofol intravenously and had an operative time of 35 minutes. Her milk propofol level was 0.13 mg/L at 300 minutes after extubation. The other mother received a total of 443 mg of propofol intravenously and had an operative time of 35 minutes. Her milk propofol level was 2.78 mg/L at 90 minutes after extubation and 0.84 mg/L 300 minutes after extubation.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four mothers who were breastfeeding their infants received propofol as part of their general anesthesia for surgical procedures. All patients also received intravenous remifentanil and rocuronium, and inhaled xenon as part of the anesthesia. They were given doses of propofol that targeted a serum concentration of 6.5 mcg/L for induction and stopped as xenon anesthesia was started. Operation times ranged from 35 to 45 minutes. Individual infants were first breastfed as follows: 1.5 hours, 2.8 hours, 4.6 hours, and 5 hours after extubation. No signs of sedation were observed in any of the infants after their first feeding or at home after discharge.[8]

### Effects on Lactation and Breastmilk

Five women who were 6 to 15 weeks postpartum were given single doses of 2 mg of midazolam and 2.5 mg/kg of propofol intravenously before undergoing general anesthesia. The women's milk output following the surgical procedure was less than half of the normal milk output of nursing mothers. The authors speculated that milk volume might be reduced postoperatively because of perioperative fluid restriction and volume losses, as well as stress-induced inhibition of milk production.[3]

A woman underwent emergency laparoscopic surgery using propofol as well as fentanyl, remifentanil, mivacurium, and dipyrone during the surgery and metamizole, piritramide, dipyrone, butylscopolamine, and metoclopramide postoperatively. Eight hours postoperatively, her milk turned bluish green, then green. Both propofol and metoclopramide have caused green urine. Thirty hours after the milk color change, propofol but not metoclopramide, was detected in milk.[7]

A randomized study compared the effects of cesarean section using general anesthesia, spinal anesthesia, or epidural anesthesia, to normal vaginal delivery on serum prolactin and oxytocin as well as time to initiation of lactation. General anesthesia was performed using propofol 2 mg/kg and rocuronium 0.6 mg/kg for induction, followed by sevoflurane and rocuronium 0.15 mg/kg as needed. Fentanyl 1 to 1.5 mcg/kg was administered after delivery. Patients in the general anesthesia group (n = 21) had higher post-procedure prolactin levels and a longer mean time to lactation initiation (25 hours) than in the other groups (10.8 to 11.8 hours). Postpartum oxytocin levels in the nonmedicated vaginal delivery group were higher than in the general and spinal anesthesia groups.[9]

A randomized, double-blind study compared the effects of intravenous propofol 0.25 mg/kg, ketamine 0.25 mg/kg, ketamine 25 mg plus propofol 25 mg, and saline placebo for pain control in mothers post-cesarean section in mothers post-cesarean section. A single dose was given immediately after clamping of the umbilical cord. The time to the first breastfeeding was 58 minutes in those who received placebo, 42.6 minutes with propofol and 25.8 minutes with propofol plus ketamine. The time was significantly shorter than the other groups with the combination.[10]

A retrospective study of women in a Turkish hospital who underwent elective cesarean section deliveries compared women who received bupivacaine spinal anesthesia (n = 170) to women who received general anesthesia (n = 78) with propofol for induction, sevoflurane for maintenance and fentanyl after delivery. No differences in breastfeeding rates were seen between the groups at 1 hour and 24 hours postpartum. However, at 6 months postpartum, 67% of women in the general anesthesia group were still breastfeeding compared to 81% in the spinal anesthesia group, which was a statistically significant difference.[11]]

A woman nursing an 8-month-old infant 6 to 8 times daily was admitted to the hospital for an appendectomy. During the procedure she received cefazolin, granisetron, ketorolac, rocuronium, succinylcholine, and sufentanil. The patient also received 2 boluses of intravenous propofol of 150 mg followed shortly thereafter by a 50 mg dose. Postoperatively, she was receiving acetaminophen, cefazolin, ibuprofen, and pantoprazole, as well as oxycodone and dimenhydrinate as needed. Twenty-two hours after the procedure, the mother extracted milk for the first time and noted it to be light green in color. Analysis of the green milk using a nonvalidated assay detected no propofol. The green color faded and was absent by postoperative day 4 when she resumed breastfeeding. The authors judged that the green color was possibly caused by propofol or one of its metabolites.[12]

A pregnant woman had an emergency cesarean section delivery in her 24^th^ week of gestation. During the procedure she received 200 mg of propofol as well as cefazolin and acetaminophen after delivery. The first milk expressed by the mother at 12 hours after the procedure was dark green. At 30 hours after the procedure is was light green and returned to a normal color by hour 48.[13]

### Alternate Drugs to Consider

Dexmedetomidine, Etomidate, Methohexital, Midazolam, Thiopental

### References

1 Vargo JJ, Delegge MH, Feld AD, et al. (2012). Multisociety sedation curriculum for gastrointestinal endoscopy. Gastroenterology.
2 Dailland P, Cockshott ID, Didier Lirzin J, et al. (1989). Intravenous propofol during cesarean section: placental transfer, concentrations in breast milk, and neonatal effects. A preliminary study. Anesthesiology.
3 Nitsun M, Szokol JW, Saleh HJ, et al. (2006). Pharmacokinetics of midazolam, propofol, and fentanyl transfer to human breast milk. Clin Pharmacol Ther.
4 Shergill AK, Ben-Menachem T, Chandrasekhara V, et al. (2012). Guidelines for endoscopy in pregnant and lactating women. Gastrointest Endosc.
5 Bhaskara B, Dayananda VP, Kannan S, et al. (2016). Effect of breastfeeding on haemodynamics and consumption of propofol and sevoflurane: A state entropy guided comparative study. Indian J Anaesth.
6 Schmitt JP, Schwoerer D, Diemunsch P, et al. (1987). Ann Fr Anesth Reanim.
7 Birkholz T, Eckardt G, Renner S, et al. (2009). Green breast milk after propofol administration. Anesthesiology.
8 Stuttmann R, Schafer C, Hilbert P, et al. (2010). The breast feeding mother and xenon anaesthesia: Four case reports. Breast feeding and xenon anaesthesia. BMC Anesthesiol.
9 Kutlucan L, Seker IS, Demiraran Y, et al. (2014). Effects of different anesthesia protocols on lactation in the postpartum period. J Turk Ger Gynecol Assoc.
10 Jaafarpour M, Vasigh A, Khajavikhan J, et al. (2017). Effect of ketofol on pain and complication after Caesarean delivery under spinal anaesthesia: A randomized double-blind clinical trial. J Clin Diagn Res.
11 Karasu D, Yilmaz C, Ozgunay SE, et al. (2018). A comparison of the effects of general anaesthesia and spinal anaesthesia on breastfeeding. C R Acad Bulg Sci.
12 Rainone A, Delucilla L, Elofer S, et al. (2018). Propofol-induced green breast milk: A case report. Can J Hosp Pharm.
13 Bulut O, Ovali F. (2020). Green breast milk: A rare side effect of propofol. J Paediatr Child Health.

## Substance Identification

### Substance Name

Propofol

### CAS Registry Number

2078-54-8

### Drug Class

Breast Feeding

Lactation

Anesthetics, Intravenous

Hypnotics and Sedatives